# Aloe

CASRN: 8001-97-6

## Drug Levels and Effects

### Summary of Use during Lactation

Aloe vera gel consists of the clear gel from the center of fresh leaves of Aloe vera and related aloes. Active ingredients include mono- and polysaccharides (e.g., acemannan, glucomannan), allantoin, enzymes (e.g., cyclooxygenase, amylase, lipase, alkaline phosphatase, carboxypeptidase), and salicylic acid. It should not be confused with Aloe latex which comes from the inner portion of the skin and contains potent anthraquinone laxatives. Aloe latex should not be used during breastfeeding.[1]

Aloe vera gel has been used topically on the nipples during nursing to help heal cracked nipples. One meta-analysis of experimental and observational studies on nipple pain and irritation concluded that Aloe vera can be considered a choice for relieving breast pain or irritation in lactating women compared with routine care or another treatment.[2] Aloe outperformed olive oil, lanolin and breastmilk in some studies.[3-6] However, another meta-analysis that focused exclusively on data from randomized controlled trials found no difference from placebo in treating nipple pain.[7] Topical aloe has also been combined with a cactus leaf preparation and massage to treat engorgement.[8] Aloe arborescens gel from leaves applied as a poultice to the nipples of nursing mothers reduced the redness of the nipples compared to a control group.[9] If Aloe is applied to the nipples, it should be washed off before nursing the infant because the taste might adversely affect nursing or cause diarrhea in the infant.[10,11] Aloe vera gel has caused itching, burning, and allergic contact dermatitis, possibly from contamination with the irritating latex from the leaves.[12,13]

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure the safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements (https://toxnet.nlm.nih.gov/help/LactMedDietarySupps.htm) is available elsewhere on the LactMed Web site.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Kopec K. Herbal medications and breastfeeding. J Hum Lact 1999;15:157-61.10578793
2 Maleki A, Youseflu S. The effectiveness of Aloe vera on relief of irritation and nipple pain in lactating women: Systematic review and meta-analysis. Obstet Gynecol Int 2022;2022:7430581.36388847
3 Saeidi R, Tafazoli M, Gholami M, et al. New treatment for nipple soreness in breastfeeding mothers: A clinical trial study. Iran J Neonatol 2015;6:48-51. http://ijn.mums.ac.ir/issue_626_671_Volume+6%2C+Issue+2%2C+Spring+2015.html
4 Eshgizade M, Moghaddam M, Moghaddam H, et al. A comparison of the efficacy of olive oil, aloe vera extract and breast milk on healing breast fissure in the breastfeeding women. Avicenna J Phytomedicine 2015;5 (Suppl 1):86-7. doi:10.22038/ajp.2015.5454
5 Alamolhoda S, Mirabi P, Mojab F. Effects of both aloe vera gel and breast milk on the improvement of nipple soreness in lactating women? A randomized controlled trial. J Herb Medicine 2020;21:100327. doi:10.1016/j.hermed.2019.100327
6 Wang R, Gong J, Liu P, et al. Effects of aloe gel on lactating women with nipple trauma. Breastfeed Med 2024;19:445-50.38529934
7 Shetty A, Halemani K, Issac A, et al. Effectiveness of the application of lanolin, aloe vera, and peppermint on nipple pain and nipple trauma in lactating mothers: A systematic review and meta-analysis. Matern Child Health J 2024;28:2013-25.39436586
8 Meng S, Deng Q, Feng C, et al. Effects of massage treatment combined with topical cactus and aloe on puerperal milk stasis. Breast Dis 2015;35:173-8.25881639
9 Tateoka Y. Effectiveness of aloe fomentation for nipple-related complications during the early puerperium period: a randomized, controlled, interventional study. BMC Res Notes 2022;15:94.35255973
10 Yarnell E. Botanical medicine in pregnancy and lactation. Altern Complement Ther 1997;3 (April):93-100. doi:10.1089/act.1997.3.93
11 Larimore W, Petrie K. Drug use during pregnancy and lactation. Prim Care 2000;27:35-53.10739456
12 Barankin B, Gross M. Nipple and areolar eczema in the breastfeeding woman. J Cutan Med Surg 2004;8:126-30.15129318
13 De Smet P. Health risks of herbal remedies: An update. Clin Pharmacol Ther 2004;76:1-17.15229459

## Substance Identification

### Substance Name

Aloe

### Scientific Name

Aloe vera

### CAS Registry Number

8001-97-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Complementary Therapies

Phytotherapy

Plants, Medicinal